# Cefixime

CASRN: 79350-37-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information is available on the use of cefixime during breastfeeding, cephalosporins are generally not be expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefixime is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ceftibuten

## Substance Identification

### Substance Name

Cefixime

### CAS Registry Number

79350-37-1

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antibacterial Agents
- Cephalosporins